# Safinamide

CASRN: 133865-89-1

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of safinamide during breastfeeding. Because of liver toxicity in nursing rat pups, the manufacturer recommends that the drug not be used in nursing mothers. Alternate agents are preferred.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Selegiline

## Substance Identification

### Substance Name

Safinamide

### CAS Registry Number

133865-89-1

### Drug Class

- Breastfeeding
- Lactation
- Antiparkinson Agents
- Monoamine Oxidase Inhibitors